# Amoxicillin and Clavulanic Acid

CASRN: 79198-29-1

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that adverse reactions in infants are uncommon during the use of amoxicillin-clavulanic acid during nursing. Amoxicillin-clavulanic acid is acceptable in nursing mothers. Monitor the infant for restlessness, diarrhea and rash.

### Drug Levels

Maternal Levels. After a single 1 gram oral dose of amoxicillin (without clavulanic acid) in 6 women, peak milk amoxicillin levels occurred 4 to 5 hours after the dose. Average milk levels were 0.69 mg/L (range 0.46 to 0.88 mg/L) at 4 hours and 0.81 mg/L (range 0.39 to 1.3 mg/L) at 5 hours after the dose.[1] Using these data, an exclusively breastfed infant would be expected to receive a maximum of about 0.1 mg/kg daily of amoxicillin with a maternal amoxicillin-clavulanate dose of 500 mg 3 times daily. This amounts to 0.25 to 0.5% of a typical infant amoxicillin dosage.

A study involving 25 breastfeeding mothers who had been taking amoxicillin (without clavulanic acid) for at least 2 days, with infants older than 4 weeks had 75 milk samples collected at multiple time points following amoxicillin administration. Pharmacokinetic modeling and Monte Carlo simulations were conducted to estimate the RID based on a maternal dosage of 4 grams daily as a worst-case scenario. The mean RID for amoxicillin was 0.055%, with a maximum value of 0.328% and a 47-fold difference between the highest and lowest RID.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A small, controlled, prospective study had mothers monitor their infants for signs of adverse effects (furring of the tongue, feeding difficulties, changes in stool frequency and consistency, diaper rash, and skin rash). Weight change and the development of jaundice were also recorded. No statistical differences in these parameters were found between the infants of the control mothers and those of the 14 mothers taking amoxicillin-clavulanate.[3]

A prospective, controlled study asked mothers who called an information service about adverse reactions experience by their breastfed infants. Mothers were taking either amoxicillin or amoxicillin-clavulanic acid. Overall, adverse reactions in the infants were statistically more frequent in the amoxicillin-clavulanic acid group (22.3%) than in the amoxicillin group (7.5%) and the rate of adverse effects was dose-related. Amoxicillin-clavulanate reactions consisted of restlessness (8.9%), diarrhea (5.9%), rash (5.9%), and constipation (1.5%), although no single adverse effect was statistically more frequent than in the amoxicillin group. One infant whose mother was taking 1.5 g daily of amoxicillin-clavulanic acid developed mildly elevated liver enzymes (AST and ALT) during maternal therapy that returned to normal 10 days after discontinuation of the drug.[4]

A 2-month-old infant breastfed since birth. His mother had taken many medications during pregnancy, but she did not recall their identity. She developed mastitis and was treated with amoxicillin-clavulanic acid 1 gram orally every 12 hours and gentamicin 160 mg intramuscularly once daily. The infant was breastfed for 10 minutes starting 15 minutes after the first dose of both drugs. About 20 minutes later, the infant developed a generalized urticaria which disappeared after 30 minutes. A few hours later, the infant breastfed again and the urticaria reappeared after 15 minutes and disappeared after an hour. After switching to formula feeding and no further infant exposure to penicillins, the reaction did not reappear with follow-up to 16 months of age. The adverse reaction was probably caused by the antibiotics in breastmilk. The drug that caused the reaction cannot be determined, but it was most likely the amoxicillin-clavulanic acid.[5]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Kafetzis DA, Siafas CA, Georgakopoulos PA, et al. Passage of cephalosporins and amoxicillin into the breast milk. Acta Paediatr Scand 1981;70:285-8 7246123
2 Baklouti S, Rigourd V, Panchaud A, et al. Population pharmacokinetic modeling of amoxicillin concentrations in human breast milk-A contribution from the ConcePTION project. Fundam Clin Pharmacol 2025;39 (S1):PM1-024.doi:10.1111/fcp.70021
3 Campbell AC, McElnay JC, Passmore CM. The excretion of ampicillin in breast milk and its effect on the suckling infant. Br J Clin Pharmacol 1991;31:230p.doi:10.1111/j.1365-2125.1991.tb05523.x
4 Benyamini L, Merlob P, Stahl B, et al. The safety of amoxicillin/clavulanic acid and cefuroxime during lactation. Ther Drug Monit 2005;27:499-502 16044108
5 Cherif F, El Aidli, S, Kastalli S, et al. Drug induced urticaria via breastfeeding. Fundam Clin Pharmacol 2009;23 (Suppl. 1):37.doi:10.1111/j.1472-8206.2009.00689.x

## Substance Identification

### Substance Name

Amoxicillin and Clavulanic Acid

### CAS Registry Number

79198-29-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-infective Agents

Antibacterial Agents

Penicillins